# Tea Tree Oil

CASRN: 68647-73-4; 85085-48-9

## Drug Levels and Effects

### Summary of Use during Lactation

Tea tree (Melaleuca alternifolia) oil contains primarily terpinen-4-ol, but more than 100 other constituents have been identified, including 1,8-cineole (eucalyptol). Tea tree oil should not be confused with cajeput oil, niauouli oil, kanuka oil, or manuka oil which are obtained from other Melaleuca species. No data exist on the safety and efficacy of tea tree oil in nursing mothers or infants. Topical tea tree oil is generally well tolerated, but should not be taken orally. Tea tree oil is usually used topically for the treatment of infections and has been used for prophylactic treatment of the nipples postpartum.[1] However, tea tree oil has estrogenic and antiandrogenic activity and numerous cases of breast enlargement in boys have been reported.[2-5] The relevance of these findings has been questioned,[6-9] but no further testing has been reported to confirm or refute the findings. Topical application around the breast should be avoided unless it is thoroughly removed before nursing.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Twelve nursing mothers who were19 weeks to 19 months postpartum ingested 100 mg of 1,8 cineole (eucalyptol) in the form of delayed-release capsules (Soledum-Klosterfrau Vertriebs GmbH, Germany) that release the drug in the intestine. Then they pumped 1 to 4 milk samples at the time they perceived the smell of eucalyptus on their breath which had been previously shown to be approximately concurrent. A total of 21 milk samples were obtained. Odor was rated by a panel of 3 to 5 experts as either smelling like eucalyptus or not. Fourteen of the samples had a distinct eucalyptus-like odor. Chemical analysis of the positive odor tests found 1,8-cineole in concentrations from 70 to about 2090 mcg/kg of milk, most in the range of 100 to 500 mcg/kg of milk. Samples with negative odor tests contained concentrations in the range of 0.98 to about 20.23 mcg/kg of milk. In one woman who donated 3 samples, the highest concentration of 71 mcg/kg occurred at 1.5 hours after ingestion, with concentrations of 1 mcg/kg before ingestion and 15 mcg/kg at 9.5 hours after ingestion.[3]

Eight women had their milk analyzed for 1,8-cineole metabolites. Ten metabolites and several enantiomers of these metabolites were detected.[10,11]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[12]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 400 mcg of 1,8-cineole. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. 1,8-Cineole reached its maximum concentration in milk after 1 hour in three participants, after 2 hours in four participants, after 3 hours in three participants, after 4 hours in three participants after 5 hours in three participants, after 6 hours in three participants and after 8 hours in one participant. Peak milk 1,8-cineole concentrations ranged from 0.98 to 10.1 mcg/L.[13]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nursing mothers who were participating in an experiment on the excretion of 1,8-cineole (eucalyptol) in breastmilk took a 100 mg capsule of 1,8-cineole orally. Although instructed not to, 12 mothers breastfed their infants during the experiment. Mothers reported that none of their infants refused their milk or breastfed less than usual. Two mothers felt that their infants were more agitated a few hours after breastfeeding. A third mother reported that the infant stopped nursing from time to time and "looked puzzled", but resumed nursing. Upon repeating the experiment 6 weeks later, the infant did not react in an unusual way during breastfeeding.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Şahin E, Yildirim F, Büyükkayaci Duman N. Effect of tea tree oil and coconut oil on nipple crack formation in the early postpartum period. Breastfeed Med 2023;18:226-32.36763614
2 Block SL. The possible link between gynecomastia, topical lavender, and tea tree oil. Pediatr Ann 2012;41:56-8.22300181
3 Kirsch F, Beauchamp J, Buettner A. Time-dependent aroma changes in breast milk after oral intake of a pharmacological preparation containing 1,8-cineole. Clin Nutr 2012;31:682-92.22405404
4 Henley DV, Lipson N, Korach KS, et al. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:479-85.17267908
5 Lopez-Rodriguez JA, Duelo Marcos M. [Unilateral gynecomastia in young male due to tea tree oil]. An Pediatr (Barc) 2014;81:e18-9.24529892
6 Dean CJ. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:2543-4.17575591
7 Kurtz JL. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:2542-4.17575593
8 Kemper KJ, Romm AJ, Gardiner P. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:2541-4.17568039
9 Kalyan S. Prepubertal gynecomastia linked to lavender and tea tree oils. N Engl J Med 2007;356:2542-4.17575592
10 Kirsch F, Buettner A. Characterisation of the metabolites of 1,8-cineole transferred into human milk: Concentrations and ratio of enantiomers. Metabolites 2013;3:47-71.24957890
11 Kirsch F, Horst K, Rohrig W, et al. Tracing metabolite profiles in human milk: Studies on the odorant 1,8-cineole transferred into breast milk after oral intake. Metabolomics 2013;3:47-71. doi:10.1007/s11306-012-0466-9
12 Debong MW, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
13 Debong MW, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198

## Substance Identification

### Substance Name

Tea Tree Oil

### Scientific Name

Melaleuca alternifolia

### CAS Registry Number

68647-73-4; 85085-48-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Local

Complementary Therapies

Oils

Phytotherapy

Plants, Medicinal